# Alectinib

CASRN: 1256580-46-7

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of alectinib during breastfeeding. Because alectinib is more than 99% bound to plasma proteins, the amount in milk is low. However, its half-life is about 33 hours and it might accumulate in the infant. The manufacturer recommends that breastfeeding be discontinued during alectinib therapy and for 1 week after the last dose.

### Drug Levels

Maternal Levels. A woman being treated with alectinib 600 mg once daily for lung cancer gave birth a normal infant. A milk sample taken postpartum contained 152 mcg/L of alectinib.[1] The time of the sample was not stated, but because of the drug’s long half-life, the timing might not be critical.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Shang M, Luo X, Wu J, et al. (2023). The safety and efficacy for the treatment of alectinib in a women with ALK-positive lung cancer delivered a healthy male neonate throughout Pregnancy: A case report. Lung Cancer.

## Substance Identification

### Substance Name

Alectinib

### CAS Registry Number

1256580-46-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Enzyme Inhibitors

Protein Kinase Inhibitors

Signal Transduction Inhibitors

Tyrosine Kinase Inhibitors